# Pralsetinib

CASRN: 2097132-94-8

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of pralsetinib during breastfeeding. Because pralsetinib is 97% bound to plasma proteins, the amount in milk is likely to be low. However, its half-life is about 22 hours and it might accumulate in the infant. The manufacturer recommends that breastfeeding be discontinued during pralsetinib therapy and for 1 week after the last dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Pralsetinib

### CAS Registry Number

2097132-94-8

### Drug Class

Breast Feeding

Lactation

Antineoplastic Agents

Enzyme Inhibitors

Protein Kinase Inhibitors

Signal Transduction Inhibitors